# Phencyclidine

CASRN: 77-10-1

## Drug Levels and Effects

### Summary of Use during Lactation

A single case of phencyclidine use has been reported in which a small amount of phencyclidine was detected in breastmilk over 6 weeks after use of an unknown quantity of the drug. Effects on the breastfed infant are unknown.

### Drug Levels

Maternal Levels. A 20-year-old pregnant woman was hospitalized 3 days after having a psychotic reaction after smoking phencyclidine. She was hospitalized and treated initially with intramuscular haloperidol and later with oral chlorpromazine. Thirty-six days later she delivered an infant. A breastmilk sample was obtained 5 days later (presumably 44 days after smoking phencyclidine). Phencyclidine was detected in breast milk at a level of 3.9 mcg/L.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Kaufman KR, Petrucha RA, Pitts FN, Jr, Weekes ME. PCP in amniotic fluid and breast milk: Case report. J Clin Psychiatry 1983;44:269-70.6863228

## Substance Identification

### Substance Name

Phencyclidine

### CAS Registry Number

77-10-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Excitatory Amino Acid Antagonists

Hallucinogens

Street Drugs